# Cholestyramine

CASRN: 11041-12-6

## Drug Levels and Effects

### Summary of Use during Lactation

Cholestyramine is a nonabsorbable resin. Because it does not enter the mother's bloodstream, it will not reach the infant via breastmilk. It is acceptable for use during lactation.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hypercholesterolemia) Colesevelam, Colestipol; (Type 2 Diabetes) Acarbose, Glipizide, Glyburide, Insulin, Metformin, Miglitol, Semaglutide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/), Tirzepatide (https://www.ncbi.nlm.nih.gov/books/n/lactmed/LM1383/)

## Substance Identification

### Substance Name

Cholestyramine

### CAS Registry Number

11041-12-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anticholesteremic Agents

Hypolipidemic Agents